# Pretomanid

CASRN: 187235-37-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of pretomanid during breastfeeding, although the estimated dose for a breastfed infant is low. If pretomanid is required by the mother, it is not a reason to discontinue breastfeeding, but until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Using a computed milk-to-plasma ratio of 0.89, one group of authors estimated that a fully breastfed infant would receive a pretomanid dosage of 1.02 mcg/kg daily with a standard maternal dose of 200 mg daily.[1] However, the authors used a nonstandard milk volume in their calculation. Using the standard 150 mL/kg daily, the estimated infant dosage would be 0.83 mcg/kg daily.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Algharably EA, Kreutz R, Gundert-Remy U. (2023). Infant exposure to antituberculosis drugs via breast milk and assessment of potential adverse effects in breastfed infants: Critical review of data. Pharmaceutics.

## Substance Identification

### Substance Name

Pretomanid

### CAS Registry Number

187235-37-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antitubercular Agents